# Bivaracetam

CASRN: 357336-20-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information on use of brivaracetam during breastfeeding indicates that infants might have serum levels in the therapeutic range with exclusive breastfeeding, but undetectable levels with partial breastfeeding. If brivaracetam is required by the mother, it is not a reason to discontinue breastfeeding, but monitor the infant for drowsiness, agitation, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of drugs. Measurement of infant serum levels may help rule out toxicity if there is a concern.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. Two mothers with seizure disorders were reported in one paper. The first mother was taking brivaracetam 75 mg twice daily during pregnancy and breastfeeding. On day 5 postpartum, 12 hours after her prior dose, her milk brivaracetam levels were 3.6 micromoles/L (764 mcg/L) in foremilk and 3.2 micromoles/L (679 mcg/L) in hindmilk. On week 3 postpartum, 12 hours after her prior dose, her milk brivaracetam levels were 3.4 (722 mcg/L) micromoles/L in foremilk and 3.2 micromoles/L (679 mcg/L) in hindmilk. A second mother was taking brivaracetam 100 mg twice daily. The second mother was taking brivaracetam 100 mg twice daily as well as lacosamide 200 mg twice daily, and perampanel 8 mg daily. Her milk brivaracetam levels were 5 micromoles/L (1.06 mg/L) on day 5 postpartum 12 hours after the previous dose and 4.5 micromoles/L (955 mcg/L) on week 5 postpartum 13 hours after the previous dose.[1]

Infant Levels. Three infants were breastfed by mothers taking brivaracetam during pregnancy and breastfeeding. One pair of twins had umbilical cord concentrations of 4.1 and 4.2 micromoles/L (870 and 892 mcg/L) at birth, one hour after that previous maternal dose of 75 mg (taken twice daily), but both infants, who were partially breastfed twice daily had undetectable (<0.47 micromoles/L; <100 mcg/L) serum concentrations at 5 days and 3 weeks postpartum. The second mother was taking brivaracetam 100 mg twice daily as well as lacosamide 200 mg twice daily, and perampanel 8 mg daily. Her infant was exclusively breastfed and had serum brivaracetam concentration of 1.2 micromoles/L (255 mcg/L) on day 1, day 5 and week 5 postpartum, which is in the lower end of the therapeutic range. At week 11 postpartum, the infant was partially breastfed and brivaracetam was undetectable in the infant’s serum.[1]

### Effects in Breastfed Infants

Three infants, including one pair of twins, were breastfed while their mothers were taking brivaracetam. The twins were partially breastfed twice daily by a mother taking only brivaracetam and the other infant was exclusively breastfed by a mother taking brivaracetam, lacosamide and perampanel for 6 weeks, then partially breastfed. None of the infants exhibited reduced wakefulness or feeding problems. At one year of age, the mothers reported normal development.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Landmark CJ, Rektorli L, Burns ML, et al. Pharmacokinetic data on brivaracetam, lacosamide and perampanel during pregnancy and lactation. Epileptic Disord 2021;23:426-31.33935028

## Substance Identification

### Substance Name

Brivaracetam

### CAS Registry Number

357336-20-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants